# Iodipamide

CASRN: 606-17-7

## Drug Levels and Effects

### Summary of Use during Lactation

Intravenous iodinated contrast media are poorly excreted into breastmilk and poorly absorbed orally so they are not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium.[1-4] However, because there is no published experience with iodipamide during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diatrizoate, Iohexol

### References

1 Webb JA, Thomsen HS, Morcos SK, et al. (2005). The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol.
2 Chen MM, Coakley FV, Kaimal A, et al. (2008). Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol.
3 Copel J, El-Sayed Y, Heine RP, et al. (2017). Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol.
4 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2022;Version 2022:106-7. https://www.acr.org/Clinical-Resources/Contrast-Manual

## Substance Identification

### Substance Name

Iodipamide

### CAS Registry Number

606-17-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents